# Carbocysteine

CASRN: 638-23-3

## Drug Levels and Effects

### Summary of Use during Lactation

Carbocysteine (carbosisteine) is not marketed in the United States, but is available without a prescription in other countries. No information is available on the clinical use of carbocysteine during breastfeeding, although absorption by the infant is likely to be low and unlikely to cause any side effects in the infant. If the mother requires carbocysteine, it is not a reason to discontinue breastfeeding; however, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Guaifenesin

## Substance Identification

### Substance Name

Carbocysteine

### CAS Registry Number

638-23-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Expectorants